# Triazolam

CASRN: 28911-01-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because little information is available on the use of triazolam during breastfeeding, an alternate hypnotic may be preferred, especially while nursing a newborn or preterm infant. Triazolam has a relatively short half-life, so occasional use while breastfeeding an older infant should pose little risk to the infant, but monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. One mother took triazolam while breastfeeding and reported no sedation in her infant.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Kelly LE, Poon S, Madadi P, et al. (2012). Neonatal benzodiazepines exposure during breastfeeding. J Pediatr.

## Substance Identification

### Substance Name

Triazolam

### CAS Registry Number

28911-01-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Benzodiazepines